# Diazoxide

CASRN: 364-98-7

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that maternal doses of oral diazoxide up to 175 mg daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants. If oral diazoxide is required by the mother, it is not a reason to discontinue breastfeeding. Monitoring of the infant’s blood glucose may be advisable, especially during the newborn period.

### Drug Levels

Maternal Levels. A woman with nesidioblastosis hypoglycemia had been on diazoxide for 30 years since the age of 4 months. Diazoxide was stopped during her pregnancies, but reinstated at week 25 of her second pregnancy in a dose of 50 mg three times daily and later the dosage schedule was 50 mg, 50 mg and 75 mg after her third meal of the day. Milk samples were taken 6 times between day 3 and day 8 postpartum. The highest concentrations in milk were 2.4 mg/L at 3 hours after a 50 mg dose and 3.1 mg/L at 3.4 hours after a 75 mg dose. The lowest measured level was 0.7 mg/L at 9 hours after a 75 mg dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One infant was partially breastfed (10 to 50% initially, then 80% at 1 month of age) by a mother taking diazoxide orally in dosages of 150 to 175 mg daily for hypoglycemia. At 30 days of age, the infant was developing normally and had experienced no episodes of hypo- or hyperglycemia.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Saito J, Kawasaki H, Adachi N, et al. Diazoxide during pregnancy and lactation: Drug levels in maternal serum, cord blood, breast milk, and infant serum: A case report. Gynecol Endocrinol 2022;38:528-30.35403531

## Substance Identification

### Substance Name

Diazoxide

### CAS Registry Number

364-98-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Vasodilator Agents

Blood Glucose

Glycemic Control